# Rusfertide

CASRN: 1628323-80-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of rusfertide during breastfeeding. Because rusfertide is more than 99% bound to plasma proteins, the amount in milk is likely to be low. Additionally, it is a peptide that is likely digested in the infant’s gastrointestinal tract, so it is unlikely to reach the clinically important levels in infant serum. Nevertheless, the manufacturer recommends that breastfeeding be discontinued during rusfertide therapy and for 30 days after the final dose because of a concern for potential infant toxicity.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Rusfertide

### CAS Registry Number

1628323-80-7

### Drug Class

Breast Feeding

Lactation

Milk, Human